# Piperacillin and Tazobactam

CASRN: 157044-21-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that piperacillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Tazobactam has not been studied in nursing mothers. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated.

### Drug Levels

Maternal Levels. No studies on the combination of piperacillin and tazobactam during breastfeeding have been reported. Piperacillin in a dosage of 4 grams intravenously every 8 hours for 3 or more days was given to 8 women. Milk levels were measured after 2 subsequent doses. After the first dose, milk levels ranged from 0.49 to 1.5 mg/L in the 3 hours after the dose. After the second dose, milk levels ranged from 1.1 to 1.9 mg/L in the 3 hours after the dose. Peak milk levels occurred 2 to 3 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Baier R, Wolnik L, Puppel H, et al. Piperacillin concentrations in milk and serum from lactating women. Proc ICAAC 1982:203

## Substance Identification

### Substance Name

Piperacillin and Tazobactam

### CAS Registry Number

157044-21-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins